# Mifepristone

CASRN: 84371-65-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that breastfeeding need not be interrupted after a single dose of mifepristone as in a medical abortion, but a dose of 200 mg might be preferable to a 600 mg dose in nursing mothers. Breastfeeding should be avoided during long-term therapy as a cortisol receptor blocker for controlling hyperglycemia. Because of its long half-life, the manufacturer recommends pumping and discarding milk during long-term therapy and for 18 to 21 days after the last dose.

### Drug Levels

Maternal Levels. Twelve women (most 6 to 12 months postpartum) who had undergone a medical abortion using mifepristone and misoprostol provided milk samples for up to 5 days after the procedure for measurement of mifepristone. In the 2 women who received a single dose of 200 mg orally, mifepristone was undetectable (<5.6 mcg/L) in breastmilk at all times. Among the 10 women who received a single oral dose of 600 mg, average mifepristone breastmilk levels were 172 mcg/L on day 1 (n = 9) ; 66 mcg/L on day 2 (n = 9); 31 mcg/L on day 3 (n = 10); 24 mcg/L on day 4 (n = 4); and 25 mcg/L on day 5 (n = 3). Breastmilk levels of mifepristone were highest in the samples collected between 6 and 9 hours after drug administration. Samples collected between 9 and 15 hours after the dose had much lower mifepristone levels. The authors estimated that a fully breastfed infant would receive a weight-adjusted dosage of 0.5% of the maternal dosage. They suggested that breastfeeding need not be interrupted after a single dose of mifepristone and that a dose of 200 mg might be preferable to a 600 mg dose in nursing mothers.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Based on animal data, some authors suggest that mifepristone used at term might shorten the onset of lactation, increase milk flow and increase the initial growth rate of breastfed infants.[2-4] However, no human data are available.

### References

1 Sääv I, Fiala C, Hämäläinen JM, et al. (2010). Medical abortion in lactating women - low levels of mifepristone in breast milk. Acta Obstet Gynecol Scand.
2 Baird DT. (1993). Antigestogens. Br Med Bull.
3 Permezel M. (1990). The antiprogesterone steroid, RU 486 (mifepristone). Aust N Z J Obstet Gynaecol.
4 Ulmann A, Dubois C. (1988). Anti-progesterones in obstetrics, ectopic pregnancies and gynaecological malignancy. Baillieres Clin Obstet Gynaecol.

## Substance Identification

### Substance Name

Mifepristone

### CAS Registry Number

84371-65-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptives, Oral, Synthetic

Contraceptives, Postcoital, Synthetic

Hormone Antagonists

Luteolytic Agents

Menstruation-Inducing Agents

Abortifacient Agents, Steroidal